# Opipramol

CASRN: 315-72-0

## Drug Levels and Effects

### Summary of Use during Lactation

Opipramol is not approved for marketing in the United States, but is available overseas. No information is available on the clinical use of opipramol during breastfeeding. Amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. However, the analytic technique used in the paper would not meet modern standards.

### Drug Levels

Maternal Levels. In an old paper, 10 women were given opipramol 100 mg orally 3 times daily for 2 days. Milk samples were obtained 3 times daily 1.5 hour before the morning dose, 3 hours after the morning dose and 3 hours after the afternoon dose. On day 2, the drug concentrations in milk averaged 40 mcg/L before the morning dose and 65 mcg/L 3 hours after the afternoon dose. The highest milk level found in any participant was 160 mcg/L.[1] If a maternal weight of 60 kg and an infant milk intake of 150 mL/kg daily are assumed, and a milk level of 65 mcg/L is used, the relative infant dose of opipramol would be 0.02%. Because of the age of the paper, the accuracy of the analytic method in this paper is questionable.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 von Kobyletzki D, Herrman B. Opipramol in breast milk? Med Welt 1970;7:267-9.5444226

## Substance Identification

### Substance Name

Opipramol

### CAS Registry Number

315-72-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents, Tricyclic

Adrenergic Uptake Inhibitors